# Bimatoprost

CASRN: 155206-00-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of bimatoprost during breastfeeding. Because of its short half-life it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants.[1,2] To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue. With the implant, plasma levels are usually undetectable, so the amount in milk is likely to be negligible.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Belkin A, Chen T, DeOliveria AR, et al. A practical guide to the pregnant and breastfeeding patient with glaucoma. Ophthalmol Glaucoma 2020;3:79-89.32672600
2 Blumen-Ohana E, Sellem E. Pregnancy & glaucoma: SFO-SFG recommendations. J Fr Ophtalmol 2020;43:63-6.31813552

## Substance Identification

### Substance Name

Bimatoprost

### CAS Registry Number

155206-00-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiglaucoma Agents

Prostaglandins